# Stiripentol

CASRN: 137767-55-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of stiripentol during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Stiripentol

### CAS Registry Number

137767-55-6

### Drug Class

- Breast Feeding
- Lactation
- Anticonvulsants